# RimabotulinumtoxinB

CASRN: 93384-44-2

## Drug Levels and Effects

### Summary of Use during Lactation

No data exist on the medical use of rimabotulinumtoxinB during breastfeeding. However, it is not detectable systemically after intramuscular use, thus excretion into breast milk is considered unlikely. The closely related drug, onabotulinumtoxinA was not detectable in the milk of two women and detectable in only minute amounts in 5 others after 40 to 92 units injected into the face. Many mothers have breastfed their infants after injection of onabotulinumtoxinA for migraine.[1] An international guideline considers onabotulinumtoxinA acceptable in breastfeeding women with chronic migraine.[2] No special precautions are required.

### Drug Levels

Maternal Levels. Published information on the medical use of rimabotulinumtoxinB during breastfeeding was not found as of the revision date.

Type A botulinum toxin was detected in the blood and stools of a nursing mother after ingesting fermented salmon eggs. She was given 2 vials of trivalent botulism antitoxin, 1 intravenously and 1 intramuscularly. A milk sample obtained 3 days after the onset of her illness and 4 hours after administration of botulinum antitoxin had no detectable botulinum toxin nor botulism organisms.[3]

Infant Levels. Type A botulinum toxin was detected in the blood and stools of a nursing mother after ingesting fermented salmon eggs. No botulinum toxin was detected in the breastfed infant's blood or stool on the day the mother was admitted to the hospital (3 days after the onset of illness) and no botulism organisms were detected in the infant's stools.[3]

### Effects in Breastfed Infants

One mother breastfed her infant while she was experiencing toxicity from botulism poisoning. She breastfed her 2-month-old infant. Although the mother died, the infant had no symptoms.[4]

A woman developed botulism after ingesting fermented salmon eggs while breastfeeding her 8-month-old breastfed (extent not stated) infant. The infant developed no signs or symptoms of botulism even though she continued to nurse throughout the mother's hospitalization.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Wong HT, Khan R, Buture A, et al. OnabotulinumtoxinA treatment for chronic migraine in pregnancy: An updated report of real-world headache and pregnancy outcomes over 14 years in Hull. Cephalalgia 2025;45:3331024251327387.40326040
2 Puledda F, Sacco S, Diener HC, et al. International Headache Society Global Practice Recommendations for Preventive Pharmacological Treatment of Migraine. Cephalalgia 2024;44:3331024241269735.39262214
3 Middaugh J. Botulism and breast milk. N Engl J Med 1978;298:343.622098
4 Douthirt C. An outbreak of botulism in Tucumcari, New Mexico. Southwest Med 1938:51–3.

## Substance Identification

### Substance Name

rimabotulinumtoxinB

### CAS Registry Number

93384-44-2

### Drug Class

Breastfeeding

Lactation

Milk, Human

Bacterial Toxins

Neuromuscular Agents

Neurotoxins